# Zinc

CASRN: 7440-66-6

## Drug Levels and Effects

### Summary of Use during Lactation

Zinc is a normal component in human milk. Typical daily doses of 15 mg or less of oral zinc from prenatal vitamins or other multimineral supplements do not alter milk zinc levels in lactating women. Mothers may therefore take zinc supplementation during lactation to achieve the recommended daily intake of 12 to 13 mg.[1] Daily oral doses between 15 and 25 mg have negligible effects on milk zinc levels. Treatment of patients with Wilson’s disease with zinc acetate up to 100 mg daily may increase zinc levels in milk, but not above the normal range.

Sublingual zinc lozenges and nasal sprays used to prevent or treat adult viral upper respiratory tract infections have not been studied during lactation. Maternal use of these remedies several times daily for short time periods, as they are typically intended to be used, would not be expected to cause harm to the breastfed infant.

Zinc deficiency in exclusively breastfed infants, whether due to inadequate maternal zinc status or to infant premature birth or other causes, should be treated with direct zinc supplementation of the infant.

### Drug Levels

Zinc is normally present in human breastmilk, mostly bound to milk proteins.[2] Reported average milk zinc levels in colostrum range from 4 to 9 mg/L, decreasing to 2 to 4 mg/L by 1 to 2 weeks postpartum, then stabilizing at 1 to 2 mg/L beyond two weeks, eventually falling below 1 mg/L by 9 months.[2-10] Levels are similar between fore- and hindmilk.[3] Mothers with less than adequate zinc intake may have slightly lower milk zinc levels compared to mothers with adequate intake, although the reported differences are of marginal clinical relevance.[9] In a U.S. study of sixty-three postpartum, lactating, mostly white, women taking a daily prenatal or multi-vitamin, those on a vegan or vegetarian diet had similar milk zinc levels compared to those on an omnivore diet.[11]

Zinc levels may be higher in preterm milk, although only limited data are available. In a study from Rio de Janeiro, Brazil, three mothers who gave birth between 28 and 36 weeks gestation had a median milk zinc level of 2.9 mg/L after 2 weeks postpartum compared to 1.2 mg/L in four mothers who gave birth at term.[2]

Maternal Levels. Forty mothers in Maryland were randomly given a once daily 25 mg elemental oral zinc supplement as zinc oxide or placebo beginning the day after delivery and continuing for 9 months. Prenatal vitamins without zinc were used during pregnancy, and the estimated average dietary zinc intake was similar between the two groups at around 11 to 12 mg daily throughout the study period. Milk was collected at 1 and 2 weeks, and at 1, 3, 6, and 9 months after delivery. Levels were approximately 4, 3.5, 2.7, 1.3, 1, and 0.65 mg/L, respectively, in both groups.[12]

In Colorado, 19 pregnant and 52 postpartum women within two weeks of delivery were randomized to receive a once daily 15 mg elemental zinc oral supplement as zinc sulfate or placebo for nine months. Milk samples were collected at baseline and then monthly. The postpartum estimated average daily dietary zinc intake was similar between the two groups at around 12 to 13 mg throughout the study period. Average milk zinc levels were not different at any time between the two groups. At baseline, 2, 4, 6, and 9 months postpartum, levels in were approximately 4, 2, 1.5, 1, and 0.8 mg/L, respectively, in both groups.[13] The same research group had previously conducted a smaller, nonrandomized study comparing 14 lactating women given a daily 15 mg zinc supplement as zinc sulfate to 25 lactating women not given a supplement. The nonsupplemented group had a slightly lower average dietary zinc intake of 10.7 mg daily during the study compared to 12.2 mg daily in the supplemented group. Average milk levels were similar between the two groups until 8 to 12 months postpartum when levels in the supplemented group were 0.8 to 1 mg/L compared to 0.5 to 0.8 mg/L in the nonsupplemented group.[14] However, participant attrition by this late stage of the study was 50 to 80%, which, along with the other study design limitations, and the lack of confirmation by the authors’ larger study, suggests that the milk zinc level differences were not necessarily attributable to supplementation.

Forty-nine mothers from Indiana who were intending to fully breastfeed took a prenatal vitamin containing either 25 mg zinc or no zinc daily beginning 1 to 2 days after delivery. Supplementation was not randomly assigned or blinded. Milk samples were collected monthly beginning at 1 month postpartum through 6 months. Estimated average daily dietary zinc intakes were about 11 to 12 mg in both groups over the study period and participant attrition was about 10% in both groups. Average milk levels were higher in the supplemented group at each time point, beginning with 2.8 and 2.3 mg/L at 1 month, to 1.1 and 0.8 mg/L after 6 months, and ranging from 0.2 to 0.5 mg/L higher throughout the study period.[15] Since there was no baseline measurement, and supplementation was not randomly assigned, the differences reported may not have been due to supplementation. Assuming the two groups were similar at baseline, based on the 0.2 to 0.5 mg/L higher milk levels in the supplemented group, an exclusively breastfed infant would be exposed to an additional zinc exposure from breastfeeding of 0.03 to 0.075 mg daily, which is not a health concern. Using the highest reported value of 2.8 mg/L at 1 month postpartum, when a fully breastfed infant would consume around 0.5 to 0.6 L of milk daily, the daily zinc exposure from milk would only be around 1.5 mg, which is not above the recommended 2 mg daily intake for young infants.[1]

One hundred and thirty-five mothers in Yazd, Iran were randomized to receive 50 mg elemental zinc twice a week or placebo beginning the first postpartum week and continued until 5 months postpartum. Estimated average daily dietary zinc intakes were 10 to 11 mg in both groups over the study period. Milk was collected at baseline and monthly. Average milk zinc levels were approximately 3.2 mg/L in both groups at baseline, then 2.2 mg/L at 1 month. At 2 and 3 months, levels were significantly different between the two groups with 1.8 mg/L and 1.6 mg/L in the supplemented and nonsupplemented groups, respectively, and 1.5 mg/L and 1.3 mg/L in the placebo group. At 4 and 5 months, milk levels were similar between the groups at approximately 1.1 mg/L at both times. Participant attrition from the study was around 25% in both groups.[16] Based on the reported 0.3 mg/L increase in milk zinc from maternal supplementation at 2 and 3 months, an exclusively breastfed infant would consume an additional 0.05 mg/kg of zinc daily from the maternal supplementation strategy used in this study. This amount is very low considering the recommended infant intake is around 0.5 mg/kg daily.[1]

One nursing mother in Japan with Wilson’s disease was taking 75 mg of zinc acetate daily. Zinc concentrations in her colostrum at 4 days postpartum and mature milk at 32 days postpartum were within the normal range of zinc in breastmilk in Japanese women.[17]

Another small study found that zinc concentrations in the mature milk of 6 women receiving oral zinc for Wilson’s disease were somewhat elevated, but within the range of control mothers not receiving zinc.[18]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Zinc deficiency in exclusively breastfed infants can occur. Clinical features include facial and groin rash, diarrhea, hair loss, disinterest in feeding, and failure to thrive. One known cause is below-normal milk zinc levels due to maternal genetic mutations affecting mammary zinc transport proteins.[19] Zinc deficiency may also occur in infants born very preterm who are not supplemented with special human milk fortifiers designed for premature babies.[20] With both causes, direct administration of zinc drops to the infant quickly corrects the deficiency and alleviate the infant’s symptoms.

Acrodermatitis enteropathica is a congenital zinc deficiency disorder caused by genetic mutations affecting the infant’s intestinal zinc transporter proteins. Breastmilk is protective against this disorder, and symptoms typically develop after weaning from breastmilk feeding.[19,21] Resuming breastmilk feeding, if possible, and direct infant supplementation with zinc drops are the recommended treatments.

Seven patients with Wilson’s disease were taking zinc in dosages of 50 to 150 mg daily. Maternal reports indicate that all infants exhibited normal development.[18]

A center in Türkiye reported 23 infants born to mothers with Wilson’s disease over a 20-year period. Twenty-one were treated with penicillamine 600 mg and zinc 100 mg daily. All infants were breastfed (extent and duration not specified). One premature infant died at 3 weeks of age (maternal drug not specified), but the other infant had no apparent complications over a median of 51 months (range 13 to 105 months) of follow-up.[22]

A patient with Wilson’s disease started taking penicillamine 250 mg once daily two weeks before delivery and continued the drug postpartum in dosages adjusted to as high as 875 mg daily as well as zinc 30 mg three times daily and pyridoxine 20 mg twice daily. She breastfed her infant for an unspecified time. At 1 year and 5 months of age, her baby remained healthy.[23]

### Effects on Lactation and Breastmilk

Certain variations in genes encoding mammary epithelial cell zinc transporter proteins are associated with reduced milk volume and altered milk content beyond zinc. This is not thought to be triggered by maternal zinc intake or zinc status and is not correctable with maternal zinc supplementation.[24]

### References

1 National Institutes of Health Office of Dietary Supplements. Zinc fact sheet for health professionals. 2021. [Accessed January 9, 2022] https://ods.od.nih.gov/factsheets/Zinc-HealthProfessional/
2 Trinta VO, Padilha PC, Petronilho S, . Total metal content and chemical speciation analysis of iron, copper, zinc and iodine in human breast milk using high-performance liquid chromatography separation and inductively coupled plasma mass spectrometry detection. Food Chem 2020;326:126978.32413760
3 Silvestre MD, Lagarda MJ, Farré R, . A study of factors that may influence the determination of copper, iron, and zinc in human milk during sampling and in sample individuals. Biol Trace Elem Res 2000;76:217-27.11049220
4 Yalçin SS, Baykan A, Yurdakök K, . The factors that affect milk-to-serum ratio for iron during early lactation. J Pediatr Hematol Oncol 2009;31:85-90.19194189
5 Arias-Borrego A, Velasco I, Gómez-Ariza JL, . Iodine deficiency disturbs the metabolic profile and elemental composition of human breast milk. Food Chem 2022;371:131329.34808765
6 Hannan MA, Faraji B, Tanguma J, . Maternal milk concentration of zinc, iron, selenium, and iodine and its relationship to dietary intakes. Biol Trace Elem Res 2009;127:6-15.18802672
7 Gibson RS, Rahmannia S, Diana A, . Association of maternal diet, micronutrient status, and milk volume with milk micronutrient concentrations in Indonesian mothers at 2 and 5 months postpartum. Am J Clin Nutr 2020;112:1039-50.32844187
8 Mahdavi R, Nikniaz L, Gayemmagami SJ. Association between zinc, copper, and iron concentrations in breast milk and growth of healthy infants in Tabriz, Iran. Biol Trace Elem Res 2010;135:174-81.19756404
9 Ortega RM, Andrés P, Martínez RM, . Zinc levels in maternal milk: The influence of nutritional status with respect to zinc during the third trimester of pregnancy. Eur J Clin Nutr 1997;51:253-8.9104576
10 Han SM, Huang F, Derraik JGB, . A nutritional supplement during preconception and pregnancy increases human milk vitamin D but not B-vitamin concentrations. Clin Nutr 2023;42:2443-56.38411017
11 Perrin MT, Pawlak R, Judd N, . Major and trace mineral composition of milk from lactating women following vegan, vegetarian and omnivore diets. Br J Nutr 2023;130:1005-12.36562211
12 Moser-Veillon PB, Reynolds RD. A longitudinal study of pyridoxine and zinc supplementation of lactating women. Am J Clin Nutr 1990;52:135-41.2360541
13 Krebs NF, Reidinger CJ, Hartley S, . Zinc supplementation during lactation: Effects on maternal status and milk zinc concentrations. Am J Clin Nutr 1995;61:1030-6.7733024
14 Krebs NF, Hambidge KM, Jacobs MA, . The effects of a dietary zinc supplement during lactation on longitudinal changes in maternal zinc status and milk zinc concentrations. Am J Clin Nutr 1985;41:560-70.3976555
15 Karra MV, Kirksey A, Galal O, . Zinc, calcium, and magnesium concentrations in milk from American and Egyptian women throughout the first 6 months of lactation. Am J Clin Nutr 1988;47:642-8.3354489
16 Khosravi HM, Jalali BA, Eftekhari MH. Effects of dietary zinc supplement during lactation on longitudinal changes in plasma and milk zinc concentration. Pak J Biol Sci 2007;10:1313-6.19069935
17 Isagawa S, Shiohira H, Hokama N, . Measurement of zinc concentration in blood and breast milk of a Wilson’s disease patient taking zinc acetate. Pharmazie 2020;75:176-7.
18 Kodama H, Anan Y, Izumi Y, . Copper and zinc concentrations in the breast milk of mothers undergoing treatment for Wilson’s disease: A prospective study. BMJ Paediatr Open 2021;5:e000948.
19 Golan Y, Kambe T, Assaraf YG. The role of the zinc transporter SLC30A2/ZnT2 in transient neonatal zinc deficiency. Metallomics 2017;9:1352-66.28665435
20 Kienast A, Roth B, Bossier C, . Zinc-deficiency dermatitis in breast-fed infants. Eur J Pediatr 2007;166:189-94.16960696
21 National Institutes of Health Genetic and Rare Diseases Information Center. Acrodermatitis enterohepathica. [Accessed February 4, 2022.] https://rarediseases.info.nih.gov/diseases/5723/acrodermatitis-enteropathica
22 Demir K, Soyer OM, Karaca C, . The course of pregnancy in Wilson’s disease-one center, 20 years’ experience. Gastroenterology 2014;146:S-1009. doi:10.1016/S0016-5085(14)63671-4
23 Prins TJ, Tun NW, Min AM, . Unable to walk or eat without assistance in pregnancy-Wilson’s disease in a resource-limited and conflict-affected setting: A case report. J Med Case Rep 2026;20:434.42527939
24 Rivera OC, Geddes DT, Barber-Zucker S, . A common genetic variant in zinc transporter ZnT2 (Thr288Ser) is present in women with low milk volume and alters lysosome function and cell energetics. Am J Physiol Cell Physiol 2020;318:C1166-c77.32320289

## Substance Identification

### Substance Name

Zinc

### CAS Registry Number

7440-66-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Minerals

Elements